# Cefotetan

CASRN: 69712-56-7

## Drug Levels and Effects

### Summary of Use during Lactation

Cefotetan is no longer marketed in the United States. A moderate amount of information indicates that cefotetan produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Cefotetan is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. After a single 1 gram dose of cefotetan to 7 women, the drug was not detected (<0.195 mg/L) in milk in 2 women at any time up to 6 hours after the dose. In the remaining 5 women, average milk levels ranged from 0.22 to 0.34 mg/L from 1 to 6 hours after the dose. The average peak level was 0.34 mg/L 4 hours after the dose, although individual peak levels ranged from 0.25 to 0.5 mg/L at 3 to 4 hours after the dose.[1]

Five women were given 1 gram of cefotetan every 12 hours intramuscularly for 2 days. Milk cefotetan levels were undetectable 1 hour after the first dose. From 4 to 10 hours, milk levels ranged from 0.3 to 0.59 mg/L, with the peak occurring 7 hours after the dose. Ten hours after the second, third and fifth doses, milk levels ranged from 0.29 to 0.37 mg/L.[2]

After a single 1 gram dose of cefotetan in 2 women, average cefotetan concentrations of 0.1 and 0.2 mg/L occurred at 2 and 4 hours after the dose, respectively. It was undetectable at 1 and 6 hours after the dose.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Cefoxitin

### References

1 Cho N, Fukunaga K, Kuni K. Fundamental and clinical studies on cefotetan (YM09330) in the field of obstetrics and gynecology. Chemotherapy (Tokyo) 1982;30 (Suppl 1):832-42.
2 Novelli A, Mazzei T, Ciuffi M, et al. The penetration of intramuscular cefotetan disodium into human extra-vascular fluid and maternal milk secretion. Chemotherapy 1983;2:337-42.
3 Matsuda S. Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol 1984;5:57-60.6743732

## Substance Identification

### Substance Name

Cefotetan

### CAS Registry Number

69712-56-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins